# Penicillamine

CASRN: 52-67-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that penicillamine is not detectable in breastmilk and no adverse effects have been reported among breastfed infants whose mothers were taking the drug. Copper and zinc levels in breastmilk are reduced in some mothers receiving penicillamine. Penicillamine has been used with apparent safety during nursing of several infants. Based on available data, it appears that penicillamine is acceptable to use during breastfeeding.

### Drug Levels

Maternal Levels. Four patients received penicillamine for Wilson’s disease in dosages of 500, 600 mg (2 patients), and 800 mg daily. Penicillamine was not detectable by HPLC in the breastmilk of any of the mothers’ milk samples.[1]

Seven patients with Wilson’s disease were taking penicillamine in dosages of 300 to 800 mg daily. Penicillamine-copper complex was not detected in any milk samples.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One woman taking penicillamine 1500 mg daily for cystinuria breastfed her infant for 3 months with no apparent adverse effects in her infant.[3]

A woman taking penicillamine in an unspecified dosage for Wilson’s disease breastfed her infant. The infant’s serum copper and zinc levels were normal. The infant fed well and developed normally.[4]

Another woman breastfed 2 infants after 2 pregnancies while being treated for Wilson’s disease with penicillamine 750 mg daily. One infant had prolonged icterus that was unlikely to have been related to the penicillamine.[5]

A center in Türkiye reported 23 infants born to mothers with Wilson’s disease over a 20-year period. Twenty-one were treated with penicillamine 600 mg and zinc 100 mg daily. All infants were breastfed (extent and duration not specified). One premature infant died at 3 weeks of age (maternal drug not specified), but the other infant had no apparent complications over a median of 51 months (range 13 to 105 months) of follow-up.[6]

A center in Germany reports 32 patients with Wilson’s disease who became pregnant. Thirteen of the patients were taking penicillamine in dosages of 600 to 1200 mg daily. Of the 31 women who delivered a live infant, 27 of them breastfed their infants (extent not stated). Four of the infants had neonatal jaundice, but its relationship to penicillamine cannot be determined. The exact number of women who breastfed while taking penicillamine is unclear in the report.[7]

Seven patients with Wilson’s disease were taking penicillamine in dosages of 300 to 800 mg daily. Maternal reports indicate that all infants exhibited normal development.[2]

A patient with Wilson’s disease started taking penicillamine 250 mg once daily two weeks before delivery and continued the drug postpartum in dosages adjusted to as high as 875 mg daily as well as zinc 30 mg three times daily and pyridoxine 20 mg twice daily. She breastfed her infant for an unspecified time. At 1 year and 5 months of age, her baby remained healthy.[8]

### Effects on Lactation and Breastmilk

In some case reports and studies, milk concentrations of copper and zinc were reduced during therapy of Wilson’s disease with penicillamine.[1,4-7,9-12]

A more recent study compared copper concentration in the milk of 7 mothers taking penicillamine compared to 25 control mothers without Wilson’s disease. The copper concentration in the colostrum (0-4 days postpartum) of women treated with penicillamine was slightly higher than normal. Copper and zinc concentrations were normal in mature breastmilk (>14 days postpartum) from all mothers treated with penicillamine, despite lower copper concentrations in maternal serum.[2]

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Auranofin, Etanercept, Gold Sodium Thiomalate, Hydroxychloroquine, Infliximab, Methotrexate, Sulfasalazine; (Wilson’s disease) Trientine

### References

1 Izumi Y. Can mothers with Wilson’s disease give her breast milk to their infant? Teikyo Med J 2012;35:17-24.
2 Kodama H, Anan Y, Izumi Y, . Copper and zinc concentrations in the breast milk of mothers undergoing treatment for Wilson’s disease: A prospective study. BMJ Paediatr Open 2021;5:e000948.
3 Gregory MC, Mansell MA. Pregnancy and cystinuria. Lancet 1983;2:1158-60.6139526
4 Bunke H, Cario WR, Schneider M. Variations in the composition of breast milk in Wilson’s disease. Kinderarztl Prax 1989;57:89-92.2724779
5 Messner U, Gunter HH, Niesert S. Wilson disease and pregnancy. Review of the literature and case report. Z Geburtshilfe Neonatol 1998;202:77-9.9654718
6 Demir K, Soyer OM, Karaca C, . The course of pregnancy in Wilson’s disease-one center, 20 years’ experience. Gastroenterology 2014;146:S-1009. doi:10.1016/S0016-5085(14)63671-4
7 Reuner U, Dinger J. Pregnancy and Wilson disease: Management and outcome of mother and newborns-experiences of a perinatal centre. Ann Transl Med 2019;7 (Suppl 2):S56.31179293
8 Prins TJ, Tun NW, Min AM, . Unable to walk or eat without assistance in pregnancy-Wilson’s disease in a resource-limited and conflict-affected setting: A case report. J Med Case Rep 2026;20:434.42527939
9 Byron MA. Treatment of rheumatic diseases. Br Med J (Clin Res Ed) 1987;294:236-8.
10 Kaga F, Kodama H, Shiga K, . Copper and zinc status in the breast milk of mothers with Wilson disease. J Inherit Metab Dis 2008;31 (Suppl. 1):157. doi:10.1007/s10545-008-9975-0
11 Ramsey-Goldman R, Schilling E. Optimum use of disease-modifying and immunosuppressive antirheumatic agents during pregnancy and lactation. Clin Immunother 1996;5:40-58. doi:10.1007/BF03259314
12 Shiga K, Kaga H, Kodama H, . Copper and zinc concentrations in the breast milk of mothers with Wilson disease and effects on infants. J Inherit Metab Dis 2006;29 (Suppl. 1):139. doi:10.1007/s10545-006-9995-6

## Substance Identification

### Substance Name

Penicillamine

### CAS Registry Number

52-67-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents